# Lutetium Lu 177 Dotatate

CASRN: 437608-50-9

## Drug Levels and Effects

### Summary of Use during Lactation

Lutetium Lu 177 dotatate is a radiolabeled somatostatin analog indicated for the treatment of somatostatin receptor-positive gastroenteropancreatic neuroendocrine tumors. No information is available on the use of lutetium Lu 177 dotatate during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during lutetium Lu 177 dotatate therapy and for 2.5 months following the last dose, which would usually mean permanently discontinuing breastfeeding of the current infant.

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[1]

### Drug Levels

Lutetium 177 decays to stable hafnium (Hf 177) with a half-life of 6.65 days, by emitting beta radiation with a maximum energy of 0.498 MeV and photonic gamma radiation of 0.208 MeV and 0.113 MeV.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Lutetium Lu 177 Dotatate

### CAS Registry Number

437608-50-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Lutetium Radioisotopes